# Faricimab

CASRN: 1607793-29-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of faricimab during breastfeeding. Because faricimab is a large protein molecule with a molecular weight of 149,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] Until more data become available, faricimab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. An alternate drug with more breastfeeding information may be preferred. Faricimab inhibits vascular endothelial growth factor (VEGF). Since VEGF is present in human milk and is thought to help in maturation of the infant’s gastrointestinal tract, concern has been raised about the maternal use of VEGF inhibitors during breastfeeding. Note that the typical alternative to breastmilk is infant formula, which contains no VEGF. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Intravitreal) Aflibercept, Bevacizumab, Ranibizumab

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808

## Substance Identification

### Substance Name

Faricimab

### CAS Registry Number

1607793-29-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Angiogenesis Inhibitors